# Centanafadine

CASRN: 924012-43-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of centanafadine during breastfeeding. Because centanafadine is over 99% bound to plasma proteins, the amount in milk is likely to be low. If centanafadine is required by the mother, it is not a reason to discontinue breastfeeding, but until more data become available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(ADHD) Amphetamine, Dextroamphetamine, Lisdexamfetamine, Methylphenidate

## Substance Identification

### Substance Name

Centanafadine

### CAS Registry Number

924012-43-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adrenergic Uptake Inhibitors

Central Nervous System Stimulants

Dopamine Agents

Serotonin Uptake Inhibitors